# Nerandomilast

CASRN: 1423719-30-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of nerandomilast during breastfeeding. Because nerandomilast is about 77% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires nerandomilast, it is not a reason to discontinue breastfeeding. Monitor the breastfed infant for diarrhea, vomiting, and adequate weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Nerandomilast

### CAS Registry Number

1423719-30-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Phosphodiesterase 4 Inhibitors